# Icotrokinra

CASRN: 2763602-16-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of icotrokinra during breastfeeding. However, because it has a high molecular weight of 1898 daltons it is likely to be poorly excreted into breastmilk and it is a peptide that is likely digested in the infant's gastrointestinal tract, so it is unlikely to reach the clinically important levels in infant serum. If the mother requires icotrokinra, it is not a reason to discontinue breastfeeding. Until more data become available, icotrokinra should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Psoriasis) Adalimumab, Certolizumab Pegol, Etanercept, Infliximab, Phototherapy, Tretinoin

## Substance Identification

### Substance Name

Icotrokinra

### CAS Registry Number

2763602-16-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antirheumatic Agents

Anti-Inflammatory Agents